# Samarium Sm 153 Lexidronam Pentasodium

CASRN: 160369-78-8

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of samarium Sm 153 lexidronam pentasodium as a therapeutic agent. No information is available on the use of samarium Sm 153 lexidronam pentasodium during breastfeeding. Most conditions treated with samarium Sm 153 would not occur in mothers wishing to nurse. However, the manufacturer recommends not administering the drug in women who wish to continue breastfeeding. Because of the relatively long half-life of samarium 153, the standard waiting period of 10 half-lives would be close to 3 weeks which might be impractical for resuming breastfeeding. The manufacturer and expert opinion recommend discontinuing breastfeeding if the agent is administered.[1]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at background levels they may safely resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[2]

### Drug Levels

Samarium Sm 153 emits both medium-energy beta particles and a gamma photon, and has a physical half-life of 1.93 days.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Bodei L, Lam M, Chiesa C, et al. (2008). EANM procedure guideline for treatment of refractory metastatic bone pain. Eur J Nucl Med Mol Imaging.
2 Stabin MG, Breitz HB. (2000). Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med.

## Substance Identification

### Substance Name

Samarium Sm 153 Lexidronam Pentasodium

### CAS Registry Number

160369-78-8

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Samarium Radioisotopes